# Cefprozil

CASRN: 92665-29-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that cefprozil produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefprozil is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Nine healthy women were given a single 1 gram dose of cefprozil orally 6 to 12 months postpartum. Milk levels of cis-cefprozil (which accounts for 90% of cefprozil) ranged from 0.7 to 1.3 mg/L during the 12 hours after the dose. The peak level averaged 3.4 mg/L at 6 hours after the dose. By 24 hours after the dose, milk cefprozil levels were 0.3 mg/L.[1,2] Using the peak milk level value and assuming that the trans-isomer adds an additional 10% to the peak, an exclusively breastfed infant would receive a maximum of 3.3% of the weight-adjusted maternal dosage.

Infant Levels. Relevant published information was not found as of the revision date

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Shyu WC, Shah VR, Campbell DA, et al. Excretion of cefprozil into human breast milk. Antimicrob Agents Chemother 1992;36:938-41.1510416
2 Shyu WC, Shah VR, Venitz J, et al. The excretion of cefprozil (CPR) into breast milk. Clin Pharmacol Ther 1992;51:182. doi:10.1038/clpt.1992.14

## Substance Identification

### Substance Name

Cefprozil

### CAS Registry Number

92665-29-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins